# Inebilizumab

CASRN: 1299440-37-1

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of inebilizumab during breastfeeding. Because inebilizumab is a large protein molecule with a molecular weight of about 149,000 Da, the amount in milk is likely to be very low.[1] Absorption is unlikely because it is probably destroyed in the infant's gastrointestinal tract.[2] Waiting for at least 2 weeks postpartum to resume therapy may minimize transfer to the infant.[3]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Stratigakis A, Paty D, Zou P, et al. A regression approach for assessing large molecular drug concentration in breast milk. Reprod Breed 2023;3:199–207. doi:10.1016/j.repbre.2023.10.003
2 Anderson PO. Monoclonal antibodies during breastfeeding. Breastfeed Med 2021;16:591–3.33956488
3 Krysko KM, Dobson R, Alroughani R, et al. Family planning considerations in people with multiple sclerosis. Lancet Neurol 2023;22:350–66.36931808

## Substance Identification

### Substance Name

Inebilizumab

### CAS Registry Number

1299440-37-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies, Monoclonal, Humanized